# Indium In 111 Oxyquinoline

CASRN: 65389-08-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Indium In 111 oxyquinoline is used to label leukocytes. See the LactMed record on Indium In 111 White Blood Cells.

### Alternate Drugs to Consider

Indium In 111 White Blood Cells

## Substance Identification

### Substance Name

Indium In 111 Oxyquinoline

### CAS Registry Number

65389-08-4

### Drug Class

- Breast Feeding
- Lactation
- Radiopharmaceuticals
- Indium Radioisotopes